# Caspofungin

CASRN: 162808-62-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of caspofungin during breastfeeding. Because caspofungin is 97% bound to plasma proteins and has poor oral bioavailability, it is unlikely to reach the milk and be absorbed by the infant. Caspofungin can safely be given intravenously to infants of aged 3 months or older. Any amount absorbed from milk is likely to be far less than an infant dose. If caspofungin is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole, Miconazole

## Substance Identification

### Substance Name

Caspofungin

### CAS Registry Number

162808-62-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents

Echinocandins